# Diltiazem

CASRN: 42399-41-7

## Drug Levels and Effects

### Summary of Use during Lactation

Based on limited data, amounts of diltiazem ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. In one patient who was 14 days postpartum, peak milk levels of 190 to 230 mcg/L occurred about 2 hours after the dose during an oral regimen of 60 mg four times daily. The levels and time course of the drug in milk closely paralleled serum levels.[1] Using the peak milk level data from this patient, an exclusively breastfed infant would receive an estimated maximum of 0.9% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nifedipine, Verapamil

### References

1 Okada M, Inoue H, Nakamura Y, et al. Excretion of diltiazem in human milk. N Engl J Med 1985;312:992-3.3974691

## Substance Identification

### Substance Name

Diltiazem

### CAS Registry Number

42399-41-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Calcium Channel Blockers

Antiarrhythmics

Vasodilator Agents